# Vitamin B_6_

CASRN: 65-23-6

## Drug Levels and Effects

### Summary of Use during Lactation

Vitamin B_6_ (pyridoxine) is an essential nutrient in the human diet and is naturally found in human milk. Maternal supplementation increases milk levels in a dose-dependent manner. The recommended maternal minimum daily pyridoxine intake during pregnancy and lactation is 2 mg. The recommended adequate daily intake for neonates and infants up to 6 months of age is 0.1 mg.[1-3] Intakes of 1 to 2 mg/kg pyridoxine daily are considered safe for neonates and infants receiving isoniazid for treatment or prevention of tuberculosis infection.[4] Mothers taking a supplemental dose of 7.5 to 20 mg daily to prevent or treat B_6_ deficiency should have milk levels that provide an adequate B_6_ intake for the exclusively breastfed infant. Lower doses increase milk levels somewhat, but may not be adequate if the mother has underlying B_6_ deficiency. Higher doses of 100 to 200 mg daily used to prevent or treat some B_6_-responsive diseases have not been studied during lactation but would not be expected to expose breastfed infants to a harmful amount.

### Drug Levels

Vitamin B_6_ refers to six similar natural isomers or vitamers: pyridoxine, pyridoxamine, pyridoxal, and each of their 5’-phosphorylated forms. After ingestion, the non-phosphorylated forms are absorbed well from the gastrointestinal tract. Each B_6_ vitamer can be enzymatically converted to the active form, pyridoxal 5′-phosphate.[5,6] Pyridoxal and pyridoxal 5′-phosphate account for approximately 70% and 15%, respectively, of vitamin B_6_ in human milk. Pyridoxine, pyridoxamine and their 5’-phosphate analogs are nearly evenly distributed among the remaining 15%.[7-10] Pyridoxine is the vitamer most often used medicinally and in multivitamin supplements because it is the most chemically stable.

Maternal Levels. Average total vitamin B_6_ concentrations are 800 to 1200 nmoL/L (140 to 200 mcg/L) in mature milk at 2 to 6 months postpartum among healthy mothers with adequate dietary intake and biochemical status not taking a B_6_ supplement.[8,10,11] Maternal B_6_ dietary intake and biochemical status positively influence milk levels.[12,13] Mothers with inadequate B_6_ intake or low status have reported average total B_6_ levels of 300 to 400 nmoL/L (50 to 70 mcg/L) in mature milk.[3,8] Low vitamin B_6_ status is defined biochemically as a blood plasma pyridoxal 5′-phosphate (PLP) level < 20 nmoL/L (<5 mcg/L).

Milk levels increase after birth with each stage of lactation. Reported colostrum levels are approximately 2-to-5-fold lower compared to after two weeks postpartum. Levels plateau by 2 to 6 months postpartum and thereafter gradually decline.[13-16] Foremilk and hindmilk levels are believed to be similar, although this has only been evaluated in two study subjects.[17] Two studies have reported 50% lower average levels in milk from mothers after preterm birth compared to those giving birth at term gestation, although underlying maternal B_6_ status was not evaluated.[14,15]

Low daily maternal doses of 2 to 4 mg pyridoxine supplementation results in milk levels similar to or slightly higher (200 to 300 mcg/L) than nonsupplemented mothers (140 to 200 mcg/L). Higher daily maternal doses of 10 to 30 mg are required to increase milk levels to near or above 500 mcg/L. At these higher dosages, exclusively breastfed infants could be exposed to 0.2 to 0.4 mg pyridoxine daily which is slightly higher than the minimal adequate daily intake of 0.1 mg, but still well below the infant treatment dose of 1 to 2 mg/kg daily.

Twenty-two exclusively breastfeeding women in North Carolina with normal B_6_ status participating in a study of postpartum weight loss and exercise were given a multivitamin supplement with 2 mg of pyridoxine once daily beginning at 4 to 6 weeks postpartum. Average total B_6_ levels in milk increased from 800 nmol/L (140 mcg/L) at baseline to 1000 nmol/L (170 mcg/L) when measured at 9 to 11 weeks.[18]

Ten postpartum women received an oral multivitamin tablet supplement containing 4 mg of pyridoxine beginning on the day of delivery. Foremilk and maternal blood was sampled on postpartum days 5 to 7 and again on days 43 to 45. Seven women who were not given a supplement served as a control group. All of the participants had adequate vitamin B_6_ status. At the first measurement, reported average milk total B_6_ levels were 225 mcg/L in the supplemented group and 128 mcg/L in the nonsupplemented group. At the second measurement, average levels were 237 and 204 mcg/L, respectively.[19] The same research group conducted a similar study in 12 different postpartum women with adequate baseline B_6_ status. Supplementation with a multivitamin containing 4 mg of pyridoxine was initiated 1 to 3 months postpartum; 6 received the daily supplement and 6 did not. At 6 months postpartum, average milk vitamin B_6_ levels were 235 and 212 mcg/L, respectively.[11] These studies indicate that low dose early postnatal pyridoxine supplementation can increase colostrum pyridoxine levels, but produce only modest changes in mature milk levels.

Eighteen postpartum women in Indiana with established lactation were given an oral multivitamin containing either 2.5, 10, or 20 mg pyridoxine to take once daily for three days. Six other postpartum women were given no supplement as a control group. All participants had similar dietary vitamin B_6_ intake, but baseline vitamin B_6_ status was not measured. Foremilk was collected at regular intervals throughout the 3-day study period. Average vitamin B_6_ levels among all the milk samples were 550, 1130, 1460, and 2440 nmol/L (90, 190, 250, and 410 mcg/L) in the no supplement, 2 mg, 10 mg, and 20 mg groups, respectively.[20] Based on these results, an exclusively breastfed infant would receive 0.06 mg/kg of pyridoxine daily from the 3-day course of 20 mg daily maternal pyridoxine supplement. This likely underestimates the infant exposure with ongoing maternal dosing beyond 3 consecutive days.

Forty-seven postpartum women in Indiana who reported taking a pyridoxine supplement during pregnancy were given an oral multivitamin containing either 2.5, 4, 7.5, or 10 mg pyridoxine to take once daily beginning after lactation was established. A 10 mL sample of milk was collected by the mothers using manual expression or a breast pump with each breastfeeding over a 24-hour period at monthly intervals between 1 and 6 months postpartum. Maternal blood was sampled at 1, 4, and 6 months postpartum for PLP measurement. Maternal dietary intakes were similar between groups during the study period. Average milk levels increased over the 6 month collection period from 800 to 1200 nmoL/L (140 to 200 mcg/L), 1200 to 1800 nmoL/L (200 to 300 mcg/L), 1800 to 2400 nmoL/L (300 to 400 mcg/L), and 1800 to 3000 nmoL/L (300 to 500 mcg/L) in the 2.5, 4, 7.5, and 10 mg groups, respectively, plateauing by 2 months in the low dose 2.5 mg group, and by 4 months in the three higher dose groups. Peak milk levels occurred 1 to 2 hours after supplement administration in the 2.5 mg group, and 3 to 4 hours after administration in the other three groups. B_6_ levels were not significantly different between the 7.5 and 10 mg groups. The highest measured peak milk level was 4400 nmoL/L (750 mcg/L) in the 10 mg group at 4 months postpartum. Milk levels were positively correlated with maternal plasma PLP levels, which were higher in the higher dose groups.[13] Based on the average milk levels reported in this study, an exclusively breastfed infant would receive 0.03 mg/kg daily from a 2.5 mg daily maternal pyridoxine supplement, and 0.08 mg/kg daily from a 10 mg daily maternal supplement.

Twenty postpartum women in Oklahoma were randomized to receive pyridoxine 2 mg or 27 mg once daily for 28 days beginning in the first week postpartum. Foremilk was collected for one 24-hour period on study days 7, 14, and 28. Dietary intakes of vitamin B_6_ during the study period were similar between the two groups. Average total vitamin B_6_ levels in milk at day 28 were 700 nmol/L (120 mcg/L) and 3200 nmol/L (540 mcg/L) in the 2 mg and 27 mg groups, respectively.[9] Based on these results, an exclusively breastfed infant would be exposed to pyridoxine 0.08 mg/kg daily from a 27 mg daily maternal supplement.

Forty mothers in Maryland were randomly given a once daily vitamin-mineral supplement containing 0.5 or 4 mg pyridoxine beginning the day after delivery and continuing for 9 months. Prenatal daily vitamins with 4 mg pyridoxine were used in all participants during pregnancy, and the estimated average dietary vitamin B_6_ intake was similar between the two groups at approximately 1.5 mg daily throughout the postpartum study period. Milk was collected at 1 and 2 weeks, and at 1, 3, 6, and 9 months postpartum. Thirty mothers remained in the trial at 6 months but only seventeen by 9 months. Average milk levels were approximately 500 nmol/L (85 mcg/L) and 1000 nmol/L (170 mcg/L) at 1 week in the 0.5 mg and 4 mg groups, respectively. Milk levels increased sharply to 1200 nmol/L (200 mcg/L) and 2200 nmol/L (370 mcg/L), respectively, by 1 month and then plateaued by 3 months at 1500 nmol (250 mcg/L) and 2300 nmoL (390 mcg/L), respectively.[21] Based on the average milk values at 3 months, an exclusively breastfed infant would be exposed to pyridoxine 0.04 mg/kg daily and 0.06 mg/kg daily from a 0.5 mg and 4 mg, respectively, daily maternal supplemental pyridoxine dose.

Seventeen postpartum lactating women in Indiana were given either a 2.5 mg or 15 mg daily pyridoxine supplement beginning on the day of hospital discharge. Prior to entering the study, all participants had been taking prenatal vitamins containing vitamin B_6_ and had normal vitamin B_6_ status at baseline. Foremilk was collected at 1, 2, 4, and 6 months postpartum. Mean maternal dietary vitamin B_6_ intake was similar between the two groups over the 6-month study period. The average total vitamin B_6_ milk content increased over the course of the study from 148 mcg/L to 212 mcg/L in the 2.5 mg group, and from 374 mcg/L to 534 mcg/L in the 15 mg group.[22] Although there was no nonsupplemented breastfed control group, the milk concentrations reported in the lower 2.5 mg dose group are similar to those reported in other studies of nonsupplemented healthy mothers. Based on these results, an exclusively breastfed infant would be exposed to 0.08 mg/kg daily from a 15 mg daily maternal supplemental pyridoxine dose. The same investigators repeated the study in a different group of lactating women using an updated assay capable of measuring individual B_6_ vitamers in milk. Eight participants were given 2.5 mg pyridoxine once daily, nine were given 15 mg, and two did not take a supplement. Each participant collected a small quantity of foremilk prior to each feeding over a 24-hour period at approximately 1 month postpartum. Pyridoxal was the dominant vitamer, providing 60 to 80% of total B_6_ milk content, in all three groups milk samples at all time points. Total B_6_ milk levels ranged from a low of approximately 730 nmol/L (120 mcg/L) prior to supplement administration, to a high of 1300 nmol/L (220 mcg/L) between 3 and 8 hours after supplement administration in the 2.5 mg group, and from 1600 to 4100 nmol/L (270 to 700 mcg/L) in the 15 mg group, respectively. Average levels from all collected samples were not reported. Milk levels did not fluctuate significantly over the 24-hour collection period in the two nonsupplemented participants, whose average milk levels were about 800 nmol/L (140 mcg/L).[23]

Eighteen lactating women in Bangladesh who were between 2 and 4 months postpartum were given a multinutrient supplement capsule containing pyridoxine 3 mg once in the morning with breakfast, and then two capsules the following morning. Milk was collected with every feeding from the same breast beginning 24 hours prior to starting supplementation and continuing until 24 hours after the two capsules were given for a total collection period of 72 hours. Median milk pyridoxal levels in each 24-hour period increased from 87 mcg/L at baseline to 214 mcg/L after the 6 mg supplementation. B_6_ levels peaked between 2 and 8 hours after a dose. The maximum reported level was 683 mcg/L, at approximately 4 hours after the 6 mg dose.[24] The main objective of this study was to document daily fluctuations in milk vitamin levels pre- and post-supplementation, which would identify ideal times for sample collection when designing vitamin supplementation studies. Based on the median levels reported in this study, an exclusively breastfed infant would be exposed to 0.03 mg/kg daily of pyridoxal from a two-day maternal regimen of 3 mg followed by 6 mg. This likely underestimates the infant exposure with ongoing maternal dosing beyond two consecutive days.

Twenty-eight lactating women in Guatemala who were between 4 and 6 months postpartum were randomized to receive a multinutrient supplement containing 3.8 mg of pyridoxal in either daily or divided doses, or no supplement. Both methods of supplement delivery resulted in similar average milk pyridoxal levels over an 8-hour milk collection period of approximately 200 mcg/L, compared to 150 mcg/L in the control group.[25] Based on the average levels reported in this study, an exclusively breastfed infant would be exposed to 0.03 mg/kg daily of pyridoxal from a 3.8 mg daily maternal dose.

One hundred forty-three lactating mothers donated a 25 mL milk sample once daily and provided a dietary record over five consecutive days. Nearly all (98%) had adequate daily pyridoxine intakes from diet and low dose (around 1 mg) multivitamin supplementation. Maternal plasma PLP was not measured. Average milk pyridoxal levels were 39.6 mcg/L. Consumption of fruit and taking a B_6_ supplement each independently influenced milk pyridoxal levels. The authors estimated that milk levels increased 2 mcg/L per daily fruit serving, and 6.3 mcg/L for each 1 mg/day of vitamin B_6_ supplementation. These modest increases would only supply the breastfed infant an additional 0.3 to 0.9 mcg of pyridoxine per day, well below the 100 mcg adequate daily intake.[26]

Infant Levels. Twenty postpartum women in Oklahoma were randomized to receive pyridoxine 2 mg or 27 mg once daily for 28 days beginning in the first postpartum week. Their infants were exclusively fed maternal milk during the 28-day study period. One-half of the infants in the 2 mg maternal supplement group were given a daily multivitamin containing 0.4 mg pyridoxine, presumably started when breastfeeding was established, although this was not stated. In addition to cord blood, maternal and infant blood was collected for assessment of B_6_ status on day 7, 14, and 28. Maternal dietary intakes of vitamin B_6_ during the study period were similar between the two groups. Average infant plasma PLP levels in the 2 mg maternal dose group decreased from 114 nmol/L in cord blood to approximately 40 nmol/L on study days 7, 14, and 28 (normal ≥20 nmol/L). In the 27 mg maternal dose group, plasma PLP levels decreased from 171 nmol/L in cord blood to approximately 110 nmol/L at 7 days, then increased to 160 nmol/L on day 14, and to 200 nmol/L on day 28. Levels in the supplemented infant group were similar to the high maternal dose group, except for slightly higher levels of approximately 250 nmol/L on days 14 and 28. Infant vitamin B_6_ status was correlated with maternal B_6_ supplemental dose and status.[9]

Seventeen postpartum lactating women were given either a 2.5 mg or 15 mg daily pyridoxine supplement beginning on the day of hospital discharge. Prior to entering the study, all maternal participants had been taking routine prenatal vitamins containing vitamin B_6_ and had normal vitamin B_6_ status. Serum was collected from infants for PLP measurements at baseline 15 days postpartum, and again at 1, 4, and 6 months postpartum. Average maternal dietary vitamin B_6_ intake, and infant solid food B_6_ intake, was similar between the two groups over the 6-month study period. Average infant plasma PLP levels were 73 nmol/L at baseline (normal ≥20 nmol/L) and remained stable in the 2.5 mg maternal supplemental group, but increased to approximately 200 nmol/L in the 15 mg maternal supplemental group.[22]

### Effects in Breastfed Infants

Twenty postpartum women were randomized to receive pyridoxine 2 mg or 27 mg once daily for 28 days beginning in the first postpartum week. One-half of the infants in the 2 mg maternal supplement group were given a daily multivitamin containing 0.4 mg pyridoxine, presumably started when breastfeeding was established, although this was not stated. Maternal dietary intakes of vitamin B_6_ during the study period were similar between the two groups. Weekly changes in weight and length Z scores were correlated with infant pyridoxine intake. Increases in weight and length Z scores over the course of the 28-day study period were similar between the directly supplemented infants and infants of mothers supplemented with 27 mg, and both were greater than nonsupplemented infants of mothers supplemented with 2 mg. However, these differences were clinically unimportant.[9]

Seventeen postpartum lactating women were given either a 2.5 mg or 15 mg daily pyridoxine supplement beginning on the day of hospital discharge and continued for 6 months, during which time their infants were exclusively breastfed. Prior to entering the study, all maternal participants had been taking routine prenatal vitamins containing vitamin B_6_ and had normal vitamin B_6_ status at baseline. In 15 of the infants, weight and length were measured at birth, and again at 1, 4, and 6 months postpartum. Both were similar between the two groups at all time points.[22]

Forty-four term, healthy infants in Finland were prospectively followed for growth and vitamin B_6_ status beginning at birth and continuing through the first 12 months postpartum. All mothers followed World Health Organization guidelines at the time which involved exclusive breastfeeding for 6 months after birth, introducing supplemental solid foods at 6 months, and waiting to wean from breastfeeding until 9 months. At 12 months all the infants were still partly breastfed. All mothers were given a 1 mg pyridoxine supplement to take once daily beginning on postpartum day 5 and most took a pyridoxine supplement during pregnancy. Maternal vitamin B_6_ status was not reported. Seven of the 44 infants developed low B_6_ status during the first 6 months postpartum. Between 6 and 9 months those 7 infants had lower weight-for-age, and length grew more slowly than study infants with adequate status. By 10 to 12 months of age, there were no longer differences.[27] This and other studies by the same group.[28] suggest that exclusive breastfeeding carries a risk of infant low vitamin B_6_ status and poor growth, despite low-dose maternal supplementation.

A term, otherwise healthy newborn developed tremors in the arm, leg, and chin shortly after delivery. The infant had been put to breast one time prior to the onset of tremors. Biochemical tests of the infant’s blood were all within normal limits except their serum vitamin B_6_ was five times the upper normal limit. The mother’s serum vitamin B_6_ was twice the upper normal limit. The mother had been taking daily prenatal vitamins containing 4 mg of pyridoxine during pregnancy. Upon discontinuation of the maternal supplement, the infant’s serum B_6_ level decreased to near the upper normal limit within a month, symptoms gradually improved, and abnormal EEG findings at 2 months of age resolved by 6 months of age.[29] Since the infant in this case only breastfed once and likely consumed only small amounts of colostrum, which has much lower levels of vitamin B_6_ than mature milk, this case likely involves vitamin B_6_ toxicity from transplacental exposure and not breastfeeding exposure. Considering the mother was not taking a high prenatal dose, this case also suggests some form of genetic variation in vitamin B_6_-dependent or metabolizing proteins in the mother and/or infant, which was not tested. Discontinuing maternal supplementation and reducing maternal dietary B_6_ intake, but continuing to breastfeed, is a reasonable approach in such a situation, since infant formula is likely to have a higher amount of vitamin B_6_.

### Effects on Lactation and Breastmilk

A systematic review found that two studies in the 1970s using very high maternal doses of 600 mg of pyridoxine daily in divided doses three times a day for 7 days begun shortly after delivery was effective at inhibiting lactation. However, these results have not been replicated in multiple other studies, nor has very high dose pyridoxine been demonstrated to reduce prolactin levels.[30] A second systematic review found dopaminergic agents to be superior to pyridoxine in suppressing postpartum lactation.[31]

A randomized, prospective, but nonmasked study compared cabergoline 1 mg (in one dose or 0.25 mg twice daily for 2 days; n = 45) to pyridoxine 200 mg 3 times daily for 7 days (n = 43) in suppressing lactation in postpartum women who did not wish to breastfeed. Treatment was initiated approximately 24 hours after delivery. Based on patient self-assessment, cabergoline was more effective than pyridoxine for suppressing lactation (78% vs 35%) and in reducing engorgement and pain (89% vs 67%) at day 7. The frequency of milk leakage was lower with cabergoline group after 7 and 14 days compared to pyridoxine (9% vs 42% and 11% vs 31%, , respectively). Headache and constipation were the most commonly reported adverse effects, occurring more frequently in cabergoline patients (15% vs 2%).[32]

### References

1 National Institutes of Health Office of Dietary Supplements. Vitamin B6 fact sheet for health professionals. 2023. https://ods.od.nih.gov/factsheets/VitaminB6-HealthProfessional
2 Chang SJ. Adequacy of maternal pyridoxine supplementation during pregnancy in relation to the vitamin B6 status and growth of neonates at birth. J Nutr Sci Vitaminol (Tokyo) 1999;45:449-58.10575635
3 Daniels L, Gibson RS, Diana A, et al. Micronutrient intakes of lactating mothers and their association with breast milk concentrations and micronutrient adequacy of exclusively breastfed Indonesian infants. Am J Clin Nutr 2019;110:391-400.31152543
4 Department of Health and Human Services. Panel on Opportunistic Infections in Children with and Exposed to HIV. Guidelines for the prevention and treatment of opportunistic infections in children with and exposed to HIV. Mycobacterium tuberculosis. 2013. https://clinicalinfo.hiv.gov/en/guidelines/hiv-clinical-guidelines-pediatric-opportunistic-infections/mycobacterium-tuberculosis
5 Ink SL, Henderson LM. Vitamin B6 metabolism. Annu Rev Nutr 1984;4:455-70.6380540
6 Ghatge MS, Al Mughram M, Omar AM, et al. Inborn errors in the vitamin B6 salvage enzymes associated with neonatal epileptic encephalopathy and other pathologies. Biochimie 2021;183:18-29.33421502
7 Hamaker B, Kirksey A, Ekanayake A, et al. Analysis of B-6 vitamers in human milk by reverse-phase liquid chromatography. Am J Clin Nutr 1985;42:650-5.4050724
8 Morrison LA, Driskell JA. Quantities of B6 vitamers in human milk by high-performance liquid chromatography Influence of maternal vitamin B6 status. J Chromatogr 1985;337:249-58.3988856
9 Kang-Yoon SA, Kirksey A, Giacoia G, et al. Vitamin B-6 status of breast-fed neonates: Influence of pyridoxine supplementation on mothers and neonates. Am J Clin Nutr 1992;56:548-58.1503068
10 Yagi T, Iwamoto S, Mizuseki R, et al. Contents of all forms of vitamin B6, pyridoxine-β-glucoside and 4-pyridoxic acid in mature milk of Japanese women according to 4-pyridoxolactone-conversion high performance liquid chromatography. J Nutr Sci Vitaminol (Tokyo) 2013;59:9-15.23535534
11 Thomas MR, Sneed SM, Wei C, et al. The effects of vitamin C, vitamin B_6_, vitamin B_12_, folic acid, riboflavin, and thiamin on the breast milk and maternal status of well-nourished women at 6 months postpartum. Am J Clin Nutr 1980;33:2151-6.7424809
12 Boylan LM, Hart S, Porter KB, et al. Vitamin B-6 content of breast milk and neonatal behavioral functioning. J Am Diet Assoc 2002;102:1433-8.12396161
13 Chang SJ, Kirksey A. Pyridoxine supplementation of lactating mothers: Relation to maternal nutrition status and vitamin B-6 concentrations in milk. Am J Clin Nutr 1990;51:826-31.2333841
14 Ford JE, Zechalko A, Murphy J, et al. Comparison of the B vitamin composition of milk from mothers of preterm and term babies. Arch Dis Child 1983;58:367-72.6859917
15 Udipi SA, Kirksey A, West K, et al. Vitamin B_6_, vitamin C and folacin levels in milk from mothers of term and preterm infants during the neonatal period. Am J Clin Nutr 1985;42:522-30.4041128
16 Karra MV, Udipi SA, Kirksey A, et al. Changes in specific nutrients in breast milk during extended lactation. Am J Clin Nutr 1986;43:495-503.3962902
17 West KD, Kirksey A. Influence of vitamin B_6_ intake on the content of the vitamin in human milk. Am J Clin Nutr 1976;29:961-9.986761
18 Lovelady CA, Williams JP, Garner KE, et al. Effect of energy restriction and exercise on vitamin B-6 status of women during lactation. Med Sci Sports Exerc 2001;33:512-8.11283424
19 Thomas MR, Kawamoto J, Sneed SM, et al. The effects of vitamin C, vitamin B_6_, and vitamin B_12_ supplementation on the breast milk and maternal status of well-nourished women. Am J Clin Nutr 1979;32:1679-85.463805
20 Styslinger L, Kirksey A. Effects of different levels of vitamin B-6 supplementation on vitamin B-6 concentrations in human milk and vitamin B-6 intakes of breastfed infants. Am J Clin Nutr 1985;41:21-31.3966421
21 Moser-Veillon PB, Reynolds RD. A longitudinal study of pyridoxine and zinc supplementation of lactating women. Am J Clin Nutr 1990;52:135-41.2360541
22 Borschel MW, Kirksey A, Hannemann RE. Effects of vitamin B6 intake on nutriture and growth of young infants. Am J Clin Nutr 1986;43:7-15.3942094
23 Hamaker BR, Kirksey A, Borschel MW. Distribution of B-6 vitamers in human milk during a 24-h period after oral supplementation with different amounts of pyridoxine. Am J Clin Nutr 1990;51:1062-6.2349920
24 Hampel D, Shahab-Ferdows S, Islam MM, et al. Vitamin concentrations in human milk vary with time within feed, circadian rhythm, and single-dose supplementation. J Nutr 2017;147:603-11.28202638
25 Donohue JA, Solomons NW, Hampel D, et al. Micronutrient supplementation of lactating Guatemalan women acutely increases infants' intake of riboflavin, thiamin, pyridoxal, and cobalamin, but not niacin, in a randomized crossover trial. Am J Clin Nutr 2020;112:669-82.32649760
26 Ureta-Velasco N, Montealegre-Pomar A, Keller K, et al. Day-to-day fluctuation in micronutrient content in human milk relative to maternal diet. Nutrients 2024;16:3727.39519559
27 Heiskanen K, Siimes MA, Salmenpera L, et al. Low vitamin B_6_ status associated with slow growth in healthy breast-fed infants. Pediatr Res 1995;38:740-6.8552443
28 Heiskanen K, Siimes MA, Perheentupa J, et al. Risk of low vitamin B_6_ status in infants breast-fed exclusively beyond six months. J Pediatr Gastroenterol Nutr 1996;23:38-44.8811522
29 Guala A, Folgori G, Silvestri M, et al. Vitamin B6 neonatal toxicity. Case Rep Pediatr 2022;2022:3171351.36524152
30 AlSaad D, Awaisu A, Elsalem S, et al. Is pyridoxine effective and safe for post-partum lactation inhibition? A systematic review. J Clin Pharm Ther 2017;42:373-82.28425124
31 Shrateh ON, Kumar KA, Jawed A, et al. Comparing pyridoxine with dopaminergic agonists (cabergoline and bromocriptine): Unveiling the strategy for lactation inhibition - A systematic review of clinical trials. J Gynecol Obstet Hum Reprod 2024;53:102783.38554942
32 Dayan-Schwartz A, Yefet E, Manal Massalha, et al. The efficiency of cabergoline versus pyridoxine for lactation inhibition - a randomized controlled trial. Am J Obstet Gynecol 2024;230:561.e1-61.e8.37827268

## Substance Identification

### Substance Name

Vitamin B_6_

### CAS Registry Number

65-23-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Vitamins